# Hydralazine

CASRN: 86-54-4

## Drug Levels and Effects

### Summary of Use during Lactation

Limited milk level and infant serum level data and a long history of use in postpartum mothers indicate that hydralazine is an acceptable antihypertensive in nursing mothers, even those nursing newborns.

### Drug Levels

Maternal Levels. In one case report, a mother taking oral hydralazine 50 mg 3 times daily for at least 8 weeks postpartum had hydralazine milk levels of about 130 mcg/L at 0.5 and 2 hours after a dose. In addition, milk contained an amount of acid-labile hydrazones with undefined pharmacologic activity. The authors estimated that a breastfed infant would receive a maximum of 13 mcg per feeding at this maternal dosage.[1]

Ten lactating women had blood and breastmilk samples analyzed within 24 hours after receiving a dose of hydralazine of between 10 and 40 mg in the first week postpartum. The analytic method measured hydralazine plus its pharmacologically active acid-labile metabolites. The average concentration of drugs in breastmilk was 240 nmol/L, which was about half of the simultaneous concentration in maternal plasma. The authors estimated that the daily dose to a breastfed infant would likely not exceed 25 mcg.[2]

Infant Levels. Two infants were breastfed after their mothers had received a dose of hydralazine between 10 and 40 mg during the first week postpartum., At 2 hours after feeding, infant serum drug concentrations were 557 and 293 nmol/L. The analytic method measured hydralazine plus its pharmacologically active acid-labile metabolites. These values were much lower than those found in a 2 kg infant who was receiving hydralazine 6 mg/kg daily directly for coarctation of the aorta. Serum levels in this infant were 6230 nmol/L before a 4 mg dose, and 8050 and 8310 nmol/L at 2 and 4 hours after the dose, respectively. Two other infants who received sterilized (100 degrees C for 10 minutes) breastmilk from their mothers who were taking hydralazine had no detectable hydralazine in their serum 2 hours after receiving the breastmilk feeding. The authors showed that expressed milk concentrations from 2 mothers were 140 nmol/L before heating and <20 nmol/L after heating.[2]

### Effects in Breastfed Infants

No adverse effects reported in one infant breastfed for 8 weeks.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Lisinopril, Quinapril, Hydrochlorothiazide, Methyldopa, Propranolol

### References

1 Liedholm H, Wåhlin-Boll E, Hanson A, et al. Transplacental passage and breast milk concentration of hydralazine. Eur J Clin Pharmacol 1982;21:417-9.7200428
2 Lamont RF, Elder MG. Transfer of hydralazine across the placenta and into breast milk. J Obstet Gynaecol 1986;7:47-8.29480117

## Substance Identification

### Substance Name

Hydralazine

### CAS Registry Number

86-54-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Vasodilator Agents